# Chromium Cr 51 Edetate

CASRN: 27849-89-4

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of chromium Cr 51 edetate (Cr 51-ethylenediamine tetraacetic acid; Cr 51-EDTA) as a diagnostic agent for the estimation of glomerular filtration rate. The United States Nuclear Regulatory Commission and other international agencies state that breastfeeding need not be interrupted after administration of Cr 51 edetate 60 MBq (1.6 mCi) or less to a nursing mother.[1-3] However, to follow the principle of keeping exposure "as low as reasonably achievable", some experts recommend nursing the infant just before administration of the radiopharmaceutical and interrupting breastfeeding for 2 to 6 hours after the dose, then expressing the milk completely once and discarding it. If the mother has expressed and saved milk prior to the examination, she can feed it to the infant during the period of nursing interruption.[4-6]

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level, she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[7]

### Drug Levels

Cr 51 is a gamma emitter with a principal photon energy of 320 keV and a physical half-life of 27.7 days. The effective half-life of Cr 51 edetate ranges from 5 to 11 hours, depending on kidney function.[4,7] and about 0.065% of an administered dose is excreted into breastmilk.[2]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mattsson S, Johansson L, Leide Svegborn S, et al. Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44 (2 Suppl):7-321.
2 Leide-Svegborn S, Ahlgren L, Johansson L, Mattsson S. Excretion of radionuclides in human breast milk after nuclear medicine examinations. Biokinetic and dosimetric data and recommendations on breastfeeding interruption. Eur J Nucl Med Mol Imaging 2016;43:808-21.26732471
3 Dilsizian V, Metter D, Palestro C, Zanzonico P. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf
4 Mountford PJ, Coakley AJ. A review of the secretion of radioactivity in human breast milk: Data, quantitative analysis and recommendations. Nucl Med Commun 1989;10:15-27.2645546
5 International Atomic Energy Agency. Radiation Protection and Safety in Medical Uses of Ionizing Radiation, IAEA Safety Standards Series No. SSG-46, IAEA, Vienna. 2018. https://www.iaea.org/publications/11102/radiation-protection-and-safety-in-medical-uses-of-ionizing-radiation
6 ARSAC notes for guidance: Good clinical practice in nuclear medicine. Notes for guidance on the clinical administration of radiopharmaceuticals and use of sealed radioactive sources. 2020. https://www.gov.uk/government/publications/arsac-notes-for-guidance
7 Stabin MG, Breitz HB. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203

## Substance Identification

### Substance Name

Chromium Cr 51 Edetate

### CAS Registry Number

27849-89-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Chromium Radioisotopes

Diagnostic Agents